# Rituximab

CASRN: 174722-31-7

## Drug Levels and Effects

### Summary of Use during Lactation

Rituximab is a genetically engineered chimeric murine/human monoclonal antibody that targets CD20, a B-cell-specific surface antigen. The amount in milk is very low. It is also likely to be partially destroyed in the infant’s gastrointestinal tract and absorption by the infant is probably minimal.[1-3] Numerous breastfed infants experienced no apparent adverse effects during maternal use of rituximab, including no adverse effect on the CD19 +B cell count. The manufacturer recommends that breastfeeding be discontinued during rituximab therapy and for 6 months after the last dose. However, professional guidelines consider rituximab to be acceptable for use during breastfeeding.[4-8] Waiting for at least 2 weeks postpartum to resume therapy may minimize transfer to the infant.[7] Breastfeeding can resume after the injection. One group recommends waiting for 4 hours after the pre-injection antihistamine dose before resuming breastfeeding.[7]

### Drug Levels

Maternal Levels. A patient who had granulomatosis with polyangiitis received rituximab 1000 mg intravenously while exclusively breastfeeding her infant. Milk samples were collected daily for 4 days starting 7 days after the infusion. Milk rituximab concentrations averaged 0.5 mcg/L (range 0.4 to 0.6 mcg/L).[2]

A woman with ANCA-associated vasculitis was treated with rituximab 500 mg intravenously at week 19 postpartum. The median concentration of rituximab in milk samples collected on 4 consecutive days was 3 mcg/L (range 0 to 4 mcg/L). The relative infant dose to the infant was estimated to be 0.007%.[9]

An international, multicenter study of patients with multiple sclerosis or neuromyelitis optica spectrum disorder collected breastmilk samples from 26 women who were receiving rituximab. Milk samples were collected at a mean of 2.6 months (range 0.1-36.0) postpartum. The women received 500 mg once (n = 2) or twice (n = 9) or 1000 mg once (n = 11) or twice (n = 4) and milk samples were collected before and up to 90 days after the dose. Where measurable, the peak concentration in milk usually occurred between 1 and 7 days after the dose. Milk concentrations were virtually undetectable at 90 days after a dose. For women who received a single 500 mg dose, the average milk concentration was 0.03 mg/L, and the peak was 0.04 mg/L. For 10 women who receive a single 1000 mg dose, the average milk concentration was 0.04 mg/L, and the peak was 0.07 mg/L. For women who received two 500 mg doses, the average milk concentration was 0.02 mg/L, and the peak was 0.1 mg/L. For women who received two 1000 mg doses, the average milk concentration was 0.2 mg/L and the peak was 0.6 mg/L. Based on the average milk levels, infants would receive a dose between 0.003 and 0.03 mg/kg daily.[10]

Six mothers with relapsing-remitting multiple sclerosis received 500 or 1,000 mg of rituximab postpartum. Breastmilk was collected at six time points: pre infusion, two days after infusion, after one week, and after one, three and five half-lives of rituximab. The highest concentration reported was in one woman who had a milk concentration of 250 mcg/L. The median average concentration in the breastmilk of the 6 women was 41 mcg/L.[11]

Infant Levels. A woman received rituximab 375 mg/square meter once weekly for 4 weeks beginning at week 30 of gestation. Her infant was born at 40 weeks of gestation and was exclusively breastfed with no major health issues. At 4 months of age, trace amounts of rituximab heavy and light chains were detected, but not quantified, in the infant’s serum. Whether the drug was acquired transplacentally or during breastfeeding was not determined.[12]

A woman with ANCA-associated vasculitis was treated with rituximab 500 mg intravenously at week 19 postpartum. She continued to breastfeed her infant (extent not stated). There was no detectable rituximab in the serum of the infant (assay limit not stated) at 4 and 24 hours after the maternal dose.[9]

Six nursing (extent not stated) mothers with relapsing-remitting multiple sclerosis received 500 or 1,000 mg of rituximab postpartum. Infant serum was collected at six time points: pre infusion, two days after infusion, after one week, and after one, three and five half-lives of rituximab. All of the measurements of rituximab concentration in the infants’ serum were below 0.01 mcg/L, and most of them below the lower limit of quantification (<0.005 mcg/L).[11]

### Effects in Breastfed Infants

A woman received rituximab 375 mg/square meter once weekly for 4 weeks beginning at week 30 of gestation. Her infant was born at 40 weeks of gestation and was exclusively breastfed with no major health issues. At 4 months of age, the infant’s B-cell population and immunoglobulin levels did not appear to be affected.[12]

A woman received an IV infusion of 1000 mg of rituximab at about 3 months postpartum. Her infant who was fully breastfed had no serious infections during the lactation period and developed normally during a 1.5 year follow-up period.[2]

A retrospective cohort study from the German Multiple Sclerosis and Pregnancy Registry database identified 5 mothers who received rituximab during breastfeeding. Three mothers receive one dose of rituximab while nursing, one received 500 mg and two received 1000 mg. The infants breastfed for 1.6, 1.8 and 0.3 months, respectively. Infant blood counts were normal at 1 to 1.5 months after the mothers’ doses. A blood count was not performed in the third infant. One infant developed omphalitis, but all had normal development. The fourth woman received rituximab 250 mg on day 55 postpartum and ocrelizumab 300 mg on day 333 postpartum. She breastfed for 22.9 months after the rituximab dose. Her infant had normal blood counts at 45 and 213 days after the rituximab dose, but had conjunctivitis and otitis media during this time.[13]

A woman was diagnosed with B-cell lymphoma at 27 weeks of pregnancy. Labor was induced at 34 4/7 weeks and treatment was begun with a standard regimen of rituximab, cyclophosphamide, doxorubicin, vincristine, and prednisone in unspecified doses on a 21-day cycle, starting on day 2 postpartum. She pumped and discarded her milk and fed her infant donor milk for the first 10 days of each cycle and then breastfed her infant for the remaining 10 days before the next treatment cycle. The 10-day period of breastfeeding abstinence was determined by using about 3 half-lives of vincristine. After completion of 4 cycles of chemotherapy, her infant was reportedly healthy and developing without any complications.[14]

A woman with ANCA-associated vasculitis was treated with rituximab 500 mg intravenously at week 19 postpartum. She continued to breastfeed her infant (extent not stated) for another 4 months. The infant did not experience any serious infections or allergies, developed normally during the following 2 years and received all recommended vaccinations.[9]

Six nursing (extent not stated) mothers with relapsing-remitting multiple sclerosis received 500 or 1000 mg of rituximab postpartum. Infants were followed for at least 5 half-lives of the drug. No apparent abnormalities in the CD19 +B cell count, white blood cell count, lymphocytes or immunoglobulin levels were detected in the infants after rituximab infusion.[11]

A multicenter study of women who were receiving either ocrelizumab (n = 30) or rituximab (n = 15) for multiple sclerosis or neuromyelitis optica spectrum disorder followed their infants. Forty-three women breastfed their infants (n = 27 exclusively, n = 16 partially) for a median of 6.4 months (range 0.3-11.7). In the first 12 months of life, all infants grew and developed normally compared to WHO standards and a group of infants who were not breastfed. Beyond minor infections common to infancy, no unexpectedly severe or frequent infections arose. Four infants between the ages of 2.1 and 6.2 months who were breastfed after maternal ocrelizumab or rituximab had IgG and CD19 levels within the normal range.[10]

A prospective single-center cohort study of infants, born in 2013 to 2022 were followed up at 6 to 36 months postpartum via telephone interviews. One hundred eighty-three infants who were breastfed during maternal monoclonal antibody therapy for multiple sclerosis or neuromyelitis optica spectrum disorder were matched to infants of disease-modifying therapy-naïve mothers. No differences were found in developmental delay, systemic antibiotic use, severe infections, or hospitalizations. Of the 183 infants, 11 were exposed to rituximab.[15]

A retrospective chart review found one term breastfed infant of a multiple sclerosis patient who received rituximab while breastfeeding (extent not stated). Rituximab was reinitiated 4 weeks postpartum. The infant had blood drawn 12.3 weeks after maternal drug initiation. The infant had a CD19 count within the normal range for age.[16]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Multiple Sclerosis) Glatiramer, Immune Globulin, Interferon Beta (Rheumatoid Arthritis) Adalimumab, Certolizumab Pegol, Etanercept, Infliximab, Tocilizumab

### References

1 Pistilli B, Bellettini G, Giovannetti E, . Chemotherapy, targeted agents, antiemetics and growth-factors in human milk: How should we counsel cancer patients about breastfeeding? Cancer Treat Rev 2013;39:207-11.23199900
2 Bragnes Y, Boshuizen R, de Vries A, . Low level of rituximab in human breast milk in a patient treated during lactation. Rheumatology (Oxford) 2017;56:1047-8.28339781
3 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488
4 Sammaritano LR, Bermas BL, Chakravarty EE, . 2020 American College of Rheumatology Guideline for the Management of Reproductive Health in Rheumatic and Musculoskeletal Diseases. Arthritis Rheumatol 2020;72:529-56.32090480
5 Dobson R, Rog D, Ovadia C, . Anti-CD20 therapies in pregnancy and breast feeding: A review and ABN guidelines. Pract Neurol 2022;23:6-14.35803727
6 Russell MD, Dey M, Flint J, . British Society for Rheumatology guideline on prescribing drugs in pregnancy and breastfeeding: Immunomodulatory anti-rheumatic drugs and corticosteroids. Rheumatology (Oxford) 2023;62:e48-e88.36318966
7 Krysko KM, Dobson R, Alroughani R, . Family planning considerations in people with multiple sclerosis. Lancet Neurol 2023;22:350-66.36931808
8 Mullan G, Ford HL, Blackall P, . UK consensus on pregnancy in multiple sclerosis: An update to ‘Association of British Neurologists’ guidance. Mult Scler 2026;32:885-96.42397849
9 Bosshard N, Zbinden A, Eriksson KK, . Rituximab and canakinumab use during lactation: No detectable serum levels in breastfed infants. Rheumatol Ther 2021;8:1043-8.33999372
10 Anderson A, Rowles W, Poole S, . Anti-CD20 monoclonal antibody therapy in postpartum women with neurological conditions. Ann Clin Transl Neurol 2023;10:2053-64.37675826
11 Rød BE, Torkildsen Ø, Myhr KM, . Safety of breast feeding during rituximab treatment in multiple sclerosis. J Neurol Neurosurg Psychiatry 2022;94:38-41.35879056
12 Jin J, Mills J, Conboy E, . In utero rituximab: Detection of rituximab in an infant at 4 months of age. Ann Allergy Asthma Immunol 2014;113:A14. http://www.sciencedirect.com/science/journal/10811206/113/5/supp/S
13 Ciplea AI, Langer-Gould A, de Vries, A, . Monoclonal antibody treatment during pregnancy and/or lactation in women with MS or neuromyelitis optica spectrum disorder. Neurol Neuroimmunol Neuroinflamm 2020;7:e723.32327455
14 Hersey AE, Giglio P, Kurt H, . Diffuse large B-cell lymphoma during third-trimester pregnancy and lactation. Obstet Gynecol 2020;135:383-6.31923071
15 Witt L, Friedmann N, Haben S, . Safety of breastfeeding under monoclonal antibodies in the offspring of mothers with multiple sclerosis or neuromyelitis optica spectrum disorder. J Neurol Neurosurg Psychiatry 2026;97:522-31.41760394
16 Shah A, Alvarez E. Absence of significant hematologic abnormalities in breastfed infants of mothers with multiple sclerosis treated with anti-CD20 therapies. Mult Scler J Exp Transl Clin 2026;12:20552173261454808.42226810

## Substance Identification

### Substance Name

Rituximab

### CAS Registry Number

174722-31-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal

Antirheumatic Agents

Antineoplastic Agents